# Montelukast

CASRN: 158966-92-8

## Drug Levels and Effects

### Summary of Use during Lactation

Very low levels of montelukast appear in breastmilk. Montelukast is approved for use in children as young as 6 months of age and has been used in neonates in dosages far greater than the amounts in breastmilk. Amounts ingested by the infant would not be expected to cause any adverse effects in breastfed infants. International guidelines consider that leukotriene receptor antagonists can be used during breastfeeding.[1,2]

### Drug Levels

Maternal Levels. Seven women were given a 10 mg dose of montelukast and provide milk samples before the dose and at 6 times over the next 12 hours. Average peak milk concentration of the drug were 9.74 mcg/L at an average of 4 hours after the dose. The average milk concentration was 5.3 mcg/L which resulted in an average daily infant dosage of 0.79 mcg/kg (range 0.4 to 1.4 mcg/kg daily) or 0.68% of the weight-adjusted maternal dosage.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Beclomethasone, Cromolyn, Terbutaline, Theophylline, Zafirlukast

### References

1 Middleton PG, Gade EJ, Aguilera C, et al. ERS/TSANZ Task Force Statement on the management of reproduction and pregnancy in women with airways diseases. Eur Respir J 2020;55:1901208 31699837
2 Bendien SA, de Kruif MD, Feitsma H, et al. Summary of the Dutch Multidisciplinary Practice Guideline on Asthma and Pregnancy. J Allergy Clin Immunol Pract 2024;12:1751-62 38513758
3 Datta P, Rewers-Felkins K, Baker T, et al. Transfer of montelukast into human milk during lactation. Breastfeed Med 2017;12:54-7 28002678

## Substance Identification

### Substance Name

Montelukast

### CAS Registry Number

158966-92-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Leukotriene Antagonists